# Nizatidine

CASRN: 76963-41-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of nizatidine in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. No special precautions are required. Histamine H2-antagonists with more extensive use might be preferred in newborns.

### Drug Levels

Maternal Levels. Three women who had been breastfeeding for 3 to 8 months were given nizatidine 150 mg orally every 12 hours for 5 doses. Milk nizatidine was measured at several times after the first and fifth doses. Peak milk levels of about 1.2 mg/L occurred about 2 hours after the dose. The mothers excreted a combined average of 96 mcg (range 55 to 137 mcg) of nizatidine into breast milk over the 12 hours after the first and last doses which was less than 0.1% of the mothers' total dose. The half-life in milk averaged less than 2 hours.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Histamine H2-receptor blockade is known to stimulate prolactin secretion.[2] No reports of hyperprolactinemia, galactorrhea or effects on breastfeeding women caused by nizatidine were found as of the revision date. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 Obermeyer BD, Bergstrom RF, Callaghan JT, et al. (1990). Secretion of nizatidine into human breast milk after single and multiple doses. Clin Pharmacol Ther.
2 Knigge UP. (1990). Histaminergic regulation of prolactin secretion. Dan Med Bull.

## Substance Identification

### Substance Name

Nizatidine

### CAS Registry Number

76963-41-2

### Drug Class

Breast Feeding

Lactation

Anti-Ulcer Agents

Histamine H2 Antagonists

Gastrointestinal Agents